# Gadodiamide

CASRN: 122795-43-1

## Drug Levels and Effects

### Summary of Use during Lactation

Gadodiamide releases more free gadolinium than some other gadolinium-containing contrast agents and has been removed from the market in several countries. Some European guidelines recommend a 24-hour interruption of breastfeeding after a dose, but guidelines developed by several North American professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[1-4] Other agents are preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother with neuromyelitis optica was nursing her 38-day-old male infant. Each breastfeeding session was about 15 minutes every 2 hours. She was given gadodiamide (dose not specified) before an MRI scan. She withheld breastfeeding for 6 to 8 hours after the injection. Her infant experienced no immediate adverse effects.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6 28937575
2 European Society of Urogenital Radiology. ESUR guidelines on contrast media. 2018;Version 10.0.http://www.esur-cm.org/index.php/en/
3 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
4 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138
5 Acar S, Keskin-Arslan E, Erol-Coskun H, et al. Gadodiamide use during breastfeeding. Reprod Toxicol 2018;80:59-60.doi:10.1016/j.reprotox.2018.07.071

## Substance Identification

### Substance Name

Gadodiamide

### CAS Registry Number

122795-43-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents